# Empagliflozin

CASRN: 864070-44-0

## Drug Levels and Effects

### Summary of Use during Lactation

Little information is available on the clinical use of empagliflozin during breastfeeding. Empagliflozin is an uncharged molecule that is 86% protein bound in plasma, so it is unlikely to pass into breastmilk in clinically important amounts. The manufacturer does not recommend empagliflozin during breastfeeding because of a theoretical risk to the infant's developing kidney. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A mother with glycogen storage disease type Ib was taking empagliflozin 20 mg daily during pregnancy and postpartum. Breastfeeding (extent and duration not stated) was successfully initiated, and the infant showed normal development at 3 months of age.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acarbose (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1/), Colesevelam (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM516/), Glipizide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM127/), Glyburide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM128/), Insulin (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM147/), Metformin (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM173/), Miglitol (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM407/), Semaglutide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/), Tirzepatide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/)

### References

1 Grünert SC, Rosenbaum-Fabian S, Schumann A, et al. Two successful pregnancies and first use of empagliflozin during pregnancy in glycogen storage disease type Ib. JIMD Rep 2022;63:303–8.35822091

## Substance Identification

### Substance Name

Empagliflozin

### CAS Registry Number

864070-44-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypoglycemic Agents

Sodium-Glucose Cotransporter 2 Inhibitors

SGLT2 Inhibitors